# Tamsulosin

CASRN: 106133-20-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although tamsulosin is not FDA approved for use in women, it is used off-label in women with kidney stones. No information is available on the use of tamsulosin during breastfeeding. Because it is 94 to 99% bound to plasma proteins, amounts in milk are likely to be small. If tamsulosin is required by the mother, it is not a reason to discontinue breastfeeding. However, the breastfed infant should be carefully monitored.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tamsulosin

### CAS Registry Number

106133-20-4

### Drug Class

Breast Feeding

Lactation

Adrenergic alpha-1 Receptor Antagonists

Urological Agents